# Doxazosin

CASRN: 74191-85-8

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of 4 mg daily produce low very levels in milk and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A woman who was nursing a 6-month-old infant received 2 doses of doxazosin 4 mg 24 hours apart. Four milk samples were obtained after the second dose. A peak milk level of 4.2 mcg/L occurred at 1 hour after the dose. The average concentration over the 18-hour study period was 2.9 mcg/L. The authors estimated that a fully breastfed infant would receive an average daily dosage of 440 ng/kg daily or about 0.6% of the maternal weight-adjusted dosage.[1]

A woman with pheochromocytoma during pregnancy was treated near term with doxazosin and metoprolol. She continued doxazosin for 3 days postpartum until adrenal surgery. Thirty hours after her last dose of 8 mg of doxazosin, the drug was undetectable (<25 mcg/L) in her breastmilk.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. However, the pharmacologically similar drug prazosin does not affect serum prolactin concentration in patients with hypertension,[3,4] indicating that doxazosin may not affect prolactin levels. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs

(Hypertension) Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Jensen BP, Dalrymple JM, Begg EJ. Transfer of doxazosin into breast milk. [corrected in J Hum Lact 2014;30: NP3-NP4]. J Hum Lact 2013;29:150-3.23439864
2 Versmissen J, Koch BC, Roofthooft DW, et al. Doxazosin treatment of phaeochromocytoma during pregnancy: Placental transfer and disposition in breast milk. Br J Clin Pharmacol 2016;82:568-9.27194370
3 Barbieri C, Caldara R, Ferrari C, et al. Metabolic effects of prazosin. Clin Pharmacol Ther 1980;27:313-6.6102000
4 Barbieri C, Ferrari C, Borzio M, et al. Metabolic effects of chronic prazosin treatment. Horm Metab Res 1980;12:331-4.6105121

## Substance Identification

### Substance Name

Doxazosin

### CAS Registry Number

74191-85-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic alpha-Antagonists

Antihypertensive Agents